# Nutmeg

CASRN: 84082-68-8

## Drug Levels and Effects

### Summary of Use during Lactation

Nutmeg (Myristica fragrans) seeds contain myristic acid, trymiristin, fatty acid glycerides and an essential oil, thought to be responsible for nutmeg intoxication, containing myristicin, elemicin, eugenol, safrole. Mace is a similar spice made from the dried covering of the nutmeg seed. Nutmeg has no specific lactation-related uses. No data exist on the safety and efficacy of nutmeg in nursing mothers or infants. Nutmeg, mace and their oils are "generally recognized as safe" (GRAS) as food ingredients by the U.S. Food and Drug Administration. High doses (e.g., a spoonful) of nutmeg can cause intoxication that includes anticholinergic symptoms. Anticholinergics may reduce lactation.[1,2] In vitro studies found that nutmeg may have antiprogesterone activity,[3] which also theoretically could affect lactation. Nutmeg and mace in amounts higher than those found in foods as a flavoring should be avoided during breastfeeding.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 1.1 mg of eugenol. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. Eugenol reached its maximum concentration in milk after 1 hour in two participants, after 2 hours in two participants, after 3 hours in three participants, after 4 hours in one participant after 5 hours in two participants, after 6 hours in three participants and after 8 hours in three participants. In seven participants, eugenol was not detected in milk. Peak milk eugenol concentrations ranged from 0.29 to 11.43 mcg/L. Eugenol concentrations averaged 200% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated eugenol into milk.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Bizzarro A, Iannucci F, Tolino A, et al. Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol 1980;7:108-11.6788407
2 Masala A, Alagna S, Devilla L, et al. Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest 1982;5:53-5.6808052
3 Zava DT, Dollbaum CM, Blen M. Estrogen and progestin bioactivity of foods, herbs, and spices. Proc Soc Exp Biol Med 1998;217:369-78.9492350
4 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198

## Substance Identification

### Substance Name

Nutmeg

### Scientific Name

Myristica fragrans; Myristica officinalis

### CAS Registry Number

84082-68-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal